# Cellulose and Citric Acid

CASRN: 77-92-9; 9004-34-6

Chemical structure

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

No data are available on cellulose and citric acid use during breastfeeding. However, the drug is not absorbed from the gastrointestinal tract, so it cannot enter the breastmilk. Cellulose and citric acid is acceptable to use during breastfeeding.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

## Substance Identification

### Substance Name

Cellulose and Citric Acid

### CAS Registry Number

77-92-9; 9004-34-6

### Drug Class

- Breastfeeding
- Lactation
- Appetite Depressants
- Gastrointestinal Agents
- Anti-Obesity Agents